# Candesartan

CASRN: 139481-59-7

## Drug Levels and Effects

### Summary of Use during Lactation

Preliminary evidence suggests that candesartan passes poorly into milk and is barely detectable in the plasma of breastfed infants. Use of candesartan is not a reason to discontinue nursing, but use caution in newborn and preterm infants.

### Drug Levels

Maternal Levels. Three women taking candesartan for at least 2 weeks donated several milk samples, either as fore-and hindmilk samples or as a total milk collection at each time, over a 24-hour period after taking a dose of the drug. Two women were taking 8 mg daily and one was taking 32 mg daily. The peak milk level was 3.78 mcg/L with the 32 mg dose and 0.69 and 1.05 mcg/L with the 8 mg doses. Peak milk times were about 7.75, 8, and 9.25 hours after the dose. The authors estimated that the infant would receive a weight-adjusted maternal dosage between 0.08 and 0.1%.[1]

Infant Levels. Two infants aged 8 and 13 months were breasted (extent not stated) by mothers taking candesartan 8 mg daily. Blood samples were taken at about 2.5 and 3.5 hours after the maternal doses (time of nursing not reported). Plasma candesartan concentrations were less than 0.2 mcg/L in both infants.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Valsartan

### References

1 Coberger ED, Jensen BP, Dalrymple JM. Transfer of candesartan into human breast milk. Obstet Gynecol 2019;134:481-4.31403599

## Substance Identification

### Substance Name

Candesartan

### CAS Registry Number

139481-59-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin II Type 1 Receptor Blockers

Angiotensin Receptor Blockers